# Methadone

CASRN: 76-99-3

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. If the mother of a newborn requires methadone, it is not a reason to discontinue breastfeeding; however, once the mother's milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of oral methadone to 2 to 3 days. Most infants receive an estimated dose of methadone ranging from 1 to 3% of the mother's weight-adjusted methadone dosage with a few receiving 5 to 6%, which is less than the dosage used for treating neonatal abstinence. Initiation of methadone postpartum or increasing the maternal dosage to greater than 100 mg daily therapeutically or by abuse while breastfeeding poses a risk of sedation and respiratory depression in the breastfed infant, especially if the infant was not exposed to methadone in utero. Several deaths of breastfed infants exposed to methadone in milk have been reported. If the baby shows signs of increased sleepiness (more than usual), breathing difficulties, or limpness, a physician should be contacted immediately. Other agents are preferred over methadone for pain control during breastfeeding. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

Women who received methadone maintenance during pregnancy and are stable should be encouraged to breastfeed their infants postpartum, unless there is another contraindication, such as use of street drugs.[1-12] Women receiving antenatal buprenorphine or buprenorphine-naloxone are more likely to initiate breastfeeding postpartum than those receiving methadone.[13] Breastfeeding may decrease, but not eliminate, neonatal withdrawal symptoms in infants who were exposed in utero. Some studies have found shorter hospital stays, durations of neonatal abstinence therapy and shorter durations of therapy among breastfed infants, although the dosage of opiates used for neonatal abstinence may not be reduced.[8,9,11,14-21] The long-term outcome of infants breastfed during maternal methadone therapy for opiate abuse has not been well studied.[22] Abrupt weaning of breastfed infants of women on methadone maintenance might result in precipitation of or an increase in infant withdrawal symptoms, and gradual weaning is advised. The breastfeeding rate among mothers taking methadone for opiate dependency has been lower than in mothers not using methadone in some studies, but this finding appears to vary by institution, indicating that other factors may be important.

### Drug Levels

Methadone is metabolized to inactive pyrrolidine and pyrroline metabolites. In adults, methadone oral bioavailability is 80 to 95%.

Maternal Levels. One mother taking 50 mg daily of oral methadone maintenance had milk sampled several times on postpartum days 4 through 8. The highest methadone breastmilk levels (100 and 120 mcg/L) were measured 4 hours after a dose. At 6 and 15 hours after a dose, the level was 40 mcg/L. Lower milk levels (20 and 30 mcg/L) were measured 0 to 3 hours after a dose.[23] Using the peak milk level from this study, an exclusively breastfed infant would receive 18 mcg/kg daily, equal to about 2% of the maternal weight-adjusted dosage.

Ten mothers who were 3 to 10 days postpartum and taking oral methadone maintenance 10 to 80 mg once daily had single milk samples that contained methadone levels ranging from 50 to 570 mcg/L.[24] Using the peak level from this study, an exclusively breastfed infant would receive a maximum of 86 mcg/kg daily of methadone, equal to about 6% of the maternal weight-adjusted dosage.

One mother taking 25 mg daily of oral methadone maintenance had breastmilk sampled twice on postpartum days 5 and 6. The peak methadone milk level was 700 mcg/L on day 5 and 600 mcg/L on day 6, both occurring 3 hours after the dose. Trough levels were about 15 mcg/L on both days.[25]

Two postpartum mothers taking oral methadone maintenance, one 73 mg once daily and the other 30 mg twice daily, had serial milk levels sampled on day 11 and 14 postpartum, respectively. Milk levels ranged from 110 to 180 mcg/L in the first mother and 110 to 250 mcg/L in the second.[26]

One lactating mother taking oral methadone maintenance 45 mg daily had milk sampled several times over the first 4 weeks postpartum and again several times over 24 hours at 6 weeks postpartum. Her colostrum methadone level was 77 mcg/L on the day of delivery and milk levels remained fairly constant (range 77 to 123 mcg/L) throughout the study period. There was little difference in milk levels before and after feeding. Peak milk levels occurred 4 to 6 hours after a dose.[27] Using the range of milk levels reported in this study, an exclusively breastfed infant would receive a maximum of about 12 to 18 mcg/kg daily, equal to 1.6 to 2.4% of the maternal weight-adjusted dosage.

Two mothers, one at 1 week and the other at 3 weeks postpartum, taking oral methadone maintenance (average 0.5 mg/kg daily), had milk levels sampled 4 to 6 times over 8 to 10 hours after a dose. Peak levels were 30 mcg/L and 70 mcg/L, and occurred 1 and 2 hours after the dose, respectively. The half-life of methadone elimination from milk over the collection period was about 8 to 10 hours in both mothers.[28] Using the milk levels reported in this study, calculated average milk levels are about 21 mcg/L and 58 mcg/L, respectively. Using these calculated average milk levels, an exclusively breastfed infant would receive about 3 to 8 mcg/kg daily of methadone, equal to 0.6 to 1.6% of the maternal weight-adjusted dosage.

Twelve breastfeeding mothers, 11 of whom were 3 to 7 days postpartum and 1 who was 26 days postpartum, were taking daily oral methadone maintenance (range 20 to 80 mg daily) and had their milk sampled once before and once after breastfeeding their infants. Milk sampling occurred 2 to 4 hours after a methadone dose. Levels after the feeding tended to be higher than before. Milk levels tended to be higher with higher maternal doses. The reported average milk level from all 12 mothers was 116 mcg/L (range 39 to 232 mcg/L). Using this average milk level, the authors calculated an average infant dose from breastmilk of 17.4 mcg/kg daily (range 5.9 to 34.8 mcg/kg daily) and an average maternal weight-adjusted dosage of 2.8% (range 1.4 to 5.1%).[29]

Eight breastfeeding mothers who were 3 weeks to 6 months postpartum and taking an average daily dosage of 102 mg of oral methadone maintenance (range 25 to 180 mg) divided twice daily during pregnancy and lactation had their milk sampled 1 to 3 times at 1 to 8 hours after a dose. The reported average milk level of all the samples from all the mothers in this study was 95 mcg/L (range 27 to 260 mcg/L). Milk levels were reportedly not related to methadone dose, but the exact timing of maternal dose and milk levels was not reported. The maximum level reported in this study occurred in a mother taking 55 mg twice daily at 110 days postpartum.[30] Using the maximum milk level reported in this study, an exclusively breastfed infant would receive about 39 mcg/kg daily, equal to about 2% of the maternal weight-adjusted dosage.

Nine breastfeeding mothers taking 22 to 230 mg of daily oral methadone maintenance had their milk sampled prior to their daily dose and several times 1 to 23 hours after the dose. Peak levels appeared to occur 2 hours after the dose. A calculated maximum infant intake of 200 mcg/kg daily was reported. The age of the infants, the individual maternal methadone doses and methadone milk levels were not reported.[31]

Eight breastfeeding mothers who were 1 to 11 days postpartum and taking 40 to 105 mg of oral methadone maintenance once daily during pregnancy and lactation had their milk sampled 6 times over 24 hours after a dose. Average milk levels in each mother were calculated from their multiple samples. The average milk level of all 8 mothers was 237 mcg/L (range 68 to 385 mcg/L). Using each of the mother's average milk level, the authors calculated an average maternal weight-adjusted dosage of 2.8%. Two of these mothers had a milk sampling at 18 and 27 days postpartum. Each was taking 75 mg daily of methadone. Their average milk levels were 254 and 165 mcg/L with an average maternal weight-adjusted dosage of 2.35 and 1.75%, respectively.[32]

Twelve mothers who were taking oral methadone maintenance during pregnancy and postpartum had their milk analyzed. Each mother collected pre- and post-feed samples by pump or hand expression just before and 3 hours after the daily methadone dose for each of the first 4 days postpartum. Their average methadone dose at delivery was 76 mg daily (range 40 to 100 mg daily). Average pre-feed trough milk levels ranged from 76 to 102 mcg/L; average post-feed trough levels ranged from 65 to 115 mcg/L. Average pre-feed peak milk levels ranged from 128 to 166 mcg/L; average post-feed peak levels ranged from 123 to 200 mcg/L. No relationship was found between maternal dose and milk levels. The authors calculated that an exclusively breastfed infant would receive the following average doses of methadone: 0.006 mg on day 1 postpartum, 0.018 mg on day 2 postpartum, 0.039 mg on day 3 postpartum and 0.084 mg on day 4 postpartum.[33] In a further analysis, 4 women were followed for 90 to 120 days postpartum. No increase in milk concentrations or infant dosage were noted over time, with an average infant intake calculated to be less than 0.33 mg daily.[34]

Three women were taking methadone for narcotic abstinence in doses of 70, 40 and 30 mg daily. Methadone milk concentrations measured before and 4 hours after the doses were in the range of 32 to 146 mcg/L with much lower amounts of the two major methadone metabolites, EDDP and EMDP.[35]

Twenty women who were taking methadone in daily dosages averaging 102 mg (range 40 to 200 mg) had methadone measured in milk samples 1 to 6 days postpartum; 16 of the 20 samples were taken between 1 and 4 hours after a dose at the approximate time of peak milk levels. The authors estimated that the maximum amount that a fully breastfed infant would receive is 20 mcg/kg daily (range 4 to 99) of R-methadone and 13 mcg/kg daily (range 2 to 71) of S-methadone in breastmilk. These amounts were 2.7% and 1.6% of the maternal weight-adjusted dosages of the 2 isomers.[36]

Infant Levels. The 4-week-old infant of a breastfeeding mother taking 45 mg of oral methadone maintenance a day had undetectable (<0.3 mcg/L) serum levels throughout the first 4 weeks of life.[27]

Eight 3- to 7-day-old term infants of mothers taking daily oral methadone maintenance (range 20 to 80 mg daily) had their blood drawn shortly after breastfeeding. Methadone was undetectable (individual assay sensitivity varied from <5 to <30 mcg/L) in 7 of the infants and was 6.5 mcg/L in 1 infant.[29]

Eight breastfed and 8 formula-fed newborn infants whose mothers were receiving methadone maintenance in a median dose of 70 mg daily (range 50 to 105 mg daily) had methadone measured in their plasma on day 14 of life. Concentrations ranged from 2.2 to 8.1 mcg/L compared with maternal plasma concentrations ranging from 134 to 939 mcg/L. No correlation was found between the infant plasma concentrations and their mother's methadone dosage, their breastfeeding status, or whether the infant received treatment for neonatal abstinence syndrome.[37]

A 1-year-old infant who was breastfed only during the night had a serum concentration of 2 mcg/L at 12 hours after breastfeeding. Maternal methadone dosage was not specified.[34]

### Effects in Breastfed Infants

One center reported 10 women who breastfed during methadone maintenance with no observed adverse effects in their infants.[24]

The death of a 5-week-old infant who was born 1 week prematurely to a former heroin-abusing mother was possibly related to methadone in breastmilk. The infant had been breastfeeding since birth, and the mother was taking an unreported daily dose of oral methadone maintenance. The medical examiner's diagnosis was methadone intoxication. A high level of methadone was found in the infant's serum at autopsy; however, the high level might have been caused by postpartum redistribution (which can be 2- to 10-fold [38]). The infant was also noted to be "obviously malnourished." Abnormal brain, liver and other organs on autopsy were also found and it appeared that the infant had been neglected.[39,40]

Three breastfed term infants of mothers taking oral methadone maintenance 45 to 70 mg daily during pregnancy and lactation had no reported adverse effects. They were cared for in a well-baby nursery after birth and discharged in good health home with their mothers at 2 to 3 days of age. At follow up over 3 weeks to 6 months of age, the infants had no symptoms of sedation or methadone withdrawal while breastfeeding. One infant who had breastfeeding discontinued at 3 weeks of age developed withdrawal symptoms of hyperirritability and sleeplessness. The other 2 infants were slowly weaned over 4 to 6 months and did not experience withdrawal upon breastfeeding discontinuation. The authors cautioned against abrupt breastfeeding discontinuation during methadone maintenance.[27]

A partially breastfed 3.5-month-old infant of a mother taking oral methadone maintenance 73 mg once daily died of sudden infant death syndrome. The mother was mostly bottle feeding the infant due to diminished milk supply. There was no methadone detected in the infant's blood at autopsy (lower limit of the assay not reported).[26]

Twelve full-term breastfed (extent not stated) newborns of mothers taking oral methadone maintenance (range 20 to 80 mg daily) during pregnancy and lactation were observed during their first week of age. Seven of these infants developed methadone withdrawal and 6 required treatments. The authors considered maternal methadone maintenance to be compatible with breastfeeding in the first week of a newborn's life but cautioned that newborn methadone withdrawal may occur despite breastfeeding.[29]

The hospital course of 88 breastfed newborns were compared to 32 non-breastfed newborns. All had mothers who were taking oral methadone maintenance at an average dose of 40 mg daily (range 5 to 175 mg daily). Although the breastfed newborns developed neonatal abstinence syndrome and required rehospitalization after discharge at the same rate as bottle-fed infants, they did have a shorter hospital stay than bottle-fed newborns.[41]

Two fully breastfed term infants of mothers taking oral methadone maintenance 70 and 130 mg daily during pregnancy and lactation had no adverse effects and required no treatment for methadone withdrawal prior to postpartum hospital discharge at 8 and 6 days of age, respectively. Both infants were rehospitalized and treated for methadone withdrawal symptoms at 6 weeks and 17 days of age, respectively, shortly after their mothers abruptly discontinued breastfeeding. The authors surmised that the appearance of symptoms were probably due to withdrawal from methadone in breastmilk.[42]

A Swiss descriptive report found that among the newborns of 84 mothers on methadone maintenance, the neonatal abstinence syndrome was less frequent in breastfed infants than in non-breastfed infants, 26% and 78%, respectively. Twenty-seven infants were breastfed and 54 were formula-fed. "Breastfed" was defined by the authors as more than 50% of feeding from breastmilk while in the hospital.[43]

A 5-week-old breastfed infant became cyanotic and required mouth-to-mouth resuscitation and intubation. The infant's urine was positive for opioids and the infant responded positively to naloxone; the level of consciousness improved over 2 days and extubation was accomplished. The infant's mother admitted to taking methadone and a hydrocodone-acetaminophen combination product that had been prescribed for migraine headache before she was breastfeeding.[44]

A retrospective review from Australia was conducted on the medical records of 190 drug-dependent mothers and their infants. One hundred forty-nine mothers were taking methadone at delivery; 62 mothers taking methadone (average dose 68.5 mg daily; maximum dose 150 mg daily) breastfed their infants and 87 mothers taking methadone (average dose 79.6 mg daily) formula-fed their infants. Breastfed infants had a longer median time to withdrawal symptoms (10 days) than formula-fed infants (3 days). Breastfed infants were less likely to require pharmacologic treatment and doses of morphine required to treat withdrawal were lower in breastfed infants. Treatment duration was also shorter in breastfed infants (85 vs. 108 days).[45]

A hospital in England reported outcomes among infants whose mothers were taking methadone maintenance during pregnancy over 2 time periods. Several changes were made in the management of mothers taking methadone between the 2 time periods. In the first time period (1991-1994), only 10% breastfed their infants (4% exclusive); in the second time period (1997-2001), 30% breastfed their infants (20% exclusive). During the second time period, the frequency of jaundice and convulsions were less frequent in all infants, even though the average maternal methadone dose was twice as high as in the earlier period. Pharmacologic treatment of the infants for withdrawal, days of hospitalization, days in intensive care, and percentage of infants admitted to intensive care were all lower during the second time period.[46]

Eight breastfed and 8 formula-fed newborn infants whose mothers were receiving methadone maintenance in a median dose of 70 mg daily (range 50 to 105 mg daily). No differences were noted between infants in the 2 groups on days 3, 14 or 30 in 9 neurobehavioral measures or on the percentage requiting pharmacologic management of withdrawal.[37] Four of these breastfed infants were followed for 6 months. No health concerns arose during this time. Another infant who was partially breastfed for 1 year had no important health or developmental problems during this time.[34]

A retrospective review of the charts of 68 newborn infants exposed to methadone in utero found that infants who were breastfed had a trend towards requiring shorter durations of treatment for neonatal abstinence syndrome, although the trend was not statistically significant.[47]

A retrospective cohort study reviewed the records of 437 newborn infants whose mothers were taking methadone maintenance therapy. Infants who were breastfed for 72 or more hours had a 45% reduced risk of experiencing neonatal abstinence syndrome compared to those who were not. Neonatal abstinence syndrome was more likely in mothers who were also receiving a benzodiazepine.[48]

A 13-month-old infant was primarily breastfed by a mother who was taking hydrocodone and acetaminophen for pain. On 2 occasions 4 hours apart, she substituted a dose of 40 mg of methadone for the acetaminophen-hydrocodone combination. The child nursed 2 and 6 hours after the second dose for 45 minutes each time, then fell asleep for 45 minutes. Forty-five minutes later, the infant's mother noted that the infant was drowsy and not responsive. Emergency responders confirmed that the baby had cyanosis, myosis, and decreased breathing. Upon arrival at the emergency room, the child was unarousable but had normal vital signs. The baby awoke after naloxone 0.2 mg was given intravenously. The infant's urine drug screen was positive for opiates, including methadone metabolites. Eighteen hours after the mother's first dose, the infant remained intermittently drowsy with oxygen saturation dropping as low as 91%. During this 18-hour time period, the infant received 4 doses of naloxone intravenously. Eventually, the baby returned to normal state of good health.[49]

A retrospective study in the United States of 128 infants exposed during pregnancy and breastfeeding to methadone found an inverse relationship between the amount of breastfeeding and duration of hospitalization for neonatal abstinence syndrome. Five of the breastfed infants were readmitted for withdrawal symptoms after discontinuing or markedly reducing breastmilk intake after discharge.[14]

A retrospective review of the charts of the infants of mothers taking methadone during pregnancy and postpartum at 2 hospitals in Maine was made. Infants who breastfed (n = 8) had lower neonatal abstinence scores than infants who were formula-fed (n = 9) or had mixed feeding (n = 11).[50]

A retrospective review of the charts of the infants of mothers taking methadone during pregnancy and postpartum at an Ontario Canada hospital was made. Infants who were breastfed (n = 14) had statistically significantly shorter hospital stays than those who were given formula or mixed feeding (n = 118).[15]

A retrospective cohort study of the infants of 354 mothers receiving methadone maintenance in Glasgow, Scotland compared the weight loss of infants who were breastfed to those who were given formula. Infants in the entire breastfed (including partial) group lost a maximum of 10.2% of body weight after birth compared with a weight loss of 8.5% in the formula-fed group and 9.3% in the exclusively breastfed subgroup. Weight loss was less in infants who were small for gestational age compared to infants with normal birth weights. Median maximal weight loss occurred on day 5 postpartum, except for exclusively breastfed infants in whom it occurred on day 4. Neither methadone dose nor polydrug abuse correlated with weight loss. These weight loss values were greater than local values for infants who were not exposed to drugs.[51]

A tertiary care hospital in British Columbia analyzed the charts of 295 women receiving methadone maintenance who delivered an infant over a 39-month period. Infants who were breastfed had a 79% reduced chance of requiring morphine to treat withdrawal symptoms than nonbreastfed infants. All infants were rooming-in, which may have assisted by increasing on-demand feeding and skin-to-skin contact.[52]

A cohort of 124 infants exposed during pregnancy to maternal medication for opioid maintenance therapy were followed postpartum in a Norwegian study. Seventy-eight infants were born to mothers taking methadone. Overall, infants who were breastfed had a lower rate of neonatal abstinence symptoms and a shorter duration of therapy for neonatal abstinence. Among infants exposed to methadone, 53% of breastfed infants and 80% of nonbreastfed infants required treatment. Breastfed infants required treatment for an average of 31 days compared with an average of 49 days among nonbreastfed.[16]

An analysis of cases in the European pharmacovigilance database (EudraVigilance), 15 cases were fatal. Of these, 11 cases were after maternal exposure to methadone and 3 were after maternal exposure to diamorphine (heroin). For 10 of the fatal cases, there were reports of maternal exposure to a single medication transmitted to infants through breast milk (range, 1 to 4 medications). Two infants whose mothers were on methadone maintenance therapy died. Both infants were heterozygous for the lower activity form of the P-glycoprotein transporter, and one had a pharmacogenetic variant for CYP2B6 thought to reduce methadone metabolism. Both also had other factors that could have contributed to their deaths. The authors state that it would inappropriate to assume that methadone from breastmilk was the sole cause of death in the infants.[38]

A study of pregnant being treated for opiate dependency with methadone at a clinic in Vienna were followed as were their newborn infants. Compared to infants who were not breastfed (n = 118), breastfed infants (n = 48) had lower average measures of neonatal abstinence, lower dosage requirements of morphine (4.35 mg vs 12.65 mg), shorter durations of treatment for neonatal abstinence (8.1 vs 17 days) and shorter hospital stays (17.2 vs 29.4 days).[53]

A retrospective chart review of 194 new mothers who were on methadone maintenance and their infants found that predominant breastfeeding during the first 2 days postpartum delayed the onset on neonatal abstinence syndrome (NAS) in the infants compared to formula feeding. However, breastfeeding did not decrease the need for treatment of the infant for NAS.[54]

A statewide retrospective database study found that infants diagnosed with NAS spent a median of 2 days less in the hospital if they were breastfed than those who were not breastfed.[55]

The results of two multicenter cohort studies were compared. The original study had 86 newborns with neonatal abstinence and the second had 113 infants. All infants had been exposed to methadone or buprenorphine in utero. Infants who were breastfed had a shorter hospitalization by 4.5 to 7.5 days than infants who were not breastfed. Infants who were exposed to buprenorphine had a shorter hospitalization by 4 to 5 days than those exposed to methadone.[56]

A systematic review of studies on the effect of breastfeeding on the outcomes of infants whose mothers were taking methadone during pregnancy and postpartum concluded that breastfeeding was associated with decreased frequency and duration of pharmacologic treatment, shorter hospital length of stay, and decreased severity of NAS.[21]

A search was performed of the shared database of all U.S. poison control centers for the time period of 2001 to 2017 for calls regarding medications and breastfeeding. Of 2319 calls in which an infant was exposed to a substance via breastmilk, 7 were classified as resulting in a major adverse effect, and three of these involved methadone. A one-month-old infant was admitted to the intensive care unit and described as being agitated and irritable and having tremors, respiratory arrest, diarrhea, drowsiness and lethargy. A 13-month-old infant was admitted to the intensive care unit with respiratory depression. A 6-month-old exposed to methadone and benzodiazepines was admitted to the intensive care unit with drowsiness, lethargy, seizure, and tremor. The dosages and extent of breastfeeding were not reported and all of the infants survived.[57]

An infant was born to a mother with opioid use disorder who was taking up to 2 grams of intravenous fentanyl daily. In the hospital she was transitioned to intravenous hydromorphone 120 mg three times daily, oral hydromorphone 32 mg every hour as needed, and methadone 70 mg daily by mouth. After 9 days of tapering the oral morphine dosage, the infant was given 72 mL of the mother’s expressed milk. On day 10, the infant received two doses of 0.1 mg of oral morphine and then breastfed for 30 minutes 3 hours after a maternal dose of 110 mg of intravenous hydromorphone. The infant was alert and active, feeding and sleeping well, and the infant’s morphine was discontinued. There were no clinically relevant episodes of apnea, bradycardia, desaturation, signs of respiratory depression, or excessive sedation. The infant continued to receive formula plus either breastfeeding or expressed milk with no clinically important adverse effects. The mother’s hydromorphone dose was tapered over 47 days while oral methadone and oral slow-release morphine were increased to 190 mg and 1200 mg daily, respectively, and she was discharged on day 58 postpartum. The extent of breastfeeding after hospital discharge was not reported. At 4 months of age, the infant scored above average on all developmental domains.[58]

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 11 deaths reported in breastfed infants associated with methadone. Further details of the cases were not reported.[59]

### Effects on Lactation and Breastmilk

Methadone can increase serum prolactin.[60] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a French multicenter prospective study of 246 pregnant women in receiving either methadone or buprenorphine for opiate dependency, 93 women were receiving methadone. Twenty-four percent of women receiving methadone breastfed their infants, which was not different from those receiving buprenorphine.[61]

Successful breastfeeding was reported in New Zealand in 15 infants whose mothers were taking methadone for pain and 18 infants whose mothers were taking methadone for maintenance of narcotic abstinence. Both groups of mothers were taking a wide range of doses with median daily dosages of 40 and 60 mg, respectively. An additional 8 infants were bottle-fed and the feeding method was unknown in 2.[62]

A woman who was not breastfeeding, but who had 2 children (breastfeeding history not stated), was prescribed methadone 30 mg daily for heroin dependency. When the dose was increased to 40 mg daily, she developed galactorrhea. Her serum prolactin levels were elevated on 3 occasions over the next year, but all other examinations were normal. Galactorrhea and amenorrhea persisted for at least 2 years with continuous methadone use. The authors of the article stated that 3 cases of hyperprolactinemia had been reported to the United Kingdom's drug regulatory agency. Causality was not proven in any of these cases.[63]

A retrospective chart review of 276 opiate-dependent mothers who delivered in a Baby Friendly Hospital found that mothers taking methadone or buprenorphine for opiate dependency were unlikely to breastfeed their infants. Only 27% of the 132 mothers on methadone maintenance initiated breastfeeding. Of all women in the study, 60% discontinued breastfeeding before discharge from the hospital.[64]

A retrospective cohort study of 150 women enrolled in a substance abuse treatment program found that women taking methadone had a higher prevalence of breastfeeding than women taking buprenorphine plus naloxone. However, this difference appeared to be related to the greater intention to breastfeed before delivery in the methadone group.[65]

A retrospective cohort study of 228 women enrolled in a perinatal substance abuse treatment program found that women taking buprenorphine had a higher prevalence of breastfeeding than women taking methadone. The intention to breastfeed before delivery was similar in both groups. Variations in the prepronociceptin and catechol-O-methyltransferase genes also affected the needed for infant drug treatment for neonatal abstinence.[66]

A small retrospective study of 19 mothers with for opiate use disorder found that mothers who were taking methadone were less likely to breastfeed their infants than mothers taking buprenorphine (29% vs 70%).[67]

In a multicenter retrospective study from 13 US hospitals, 768 infants with neonatal opioid withdrawal syndrome were identified. Their mothers who were receiving buprenorphine or buprenorphine-naloxone during pregnancy were 2.1 times more likely to initiate breastfeeding in the hospital than mothers receiving methadone during pregnancy.[13]

### Alternate Drugs to Consider

(Analgesia) Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine; (Opiate Dependency) Buprenorphine, Naltrexone

### References

1 Bagley SM, Wachman EM, Holland E, et al. Review of the assessment and management of neonatal abstinence syndrome. Addict Sci Clin Pract 2014;9:19.25199822
2 Kocherlakota P. Neonatal abstinence syndrome. Pediatrics 2014;134:e547–61.25070299
3 Mozurkewich EL, Rayburn WF. Buprenorphine and methadone for opioid addiction during pregnancy. Obstet Gynecol Clin North Am 2014;41:241–53.24845488
4 Sutter MB, Leeman L, Hsi A. Neonatal opioid withdrawal syndrome. Obstet Gynecol Clin North Am 2014;41:317–34.24845493
5 Lefevere J, Allegaert K. Question: is breastfeeding useful in the management of neonatal abstinence syndrome? Arch Dis Child 2015;100:414–5.25784740
6 Reece-Stremtan S, Marinelli KA. ABM clinical protocol #21: Guidelines for breastfeeding and substance use or substance use disorder, revised 2015. Breastfeed Med 2015;10:135–41.25836677
7 Cleveland LM. Breastfeeding recommendations for women who receive medication-assisted treatment for opioid use disorders: AWHONN Practice Brief Number 4. Nurs Womens Health 2016;20:432–4.27520608
8 McQueen K, Murphy-Oikonen J. Neonatal abstinence syndrome. N Engl J Med 2016;375:2468–79.28002715
9 Holmes AP, Schmidlin HN, Kurzum EN. Breastfeeding considerations for mothers of infants with neonatal abstinence syndrome. Pharmacotherapy 2017;37:861–9.28488805
10 Committee Opinion No. 711: Opioid use and opioid use disorder in pregnancy. Obstet Gynecol 2017;130:e81–e94.28742676
11 Bogen DL, Whalen BL. Breastmilk feeding for mothers and infants with opioid exposure: What is best? Semin Fetal Neonatal Med 2019;24:95–104.30922811
12 Harris M, Schiff DM, Saia K, et al. Academy of Breastfeeding Medicine Clinical Protocol #21: Breastfeeding in the setting of substance use and substance use disorder (Revised 2023). Breastfeed Med 2023;18:715–33.37856658
13 Hall RW, Babineau DC, Bangdiwala AS, et al. Association between medication for opioid use disorder during pregnancy and neonatal outcomes. J Perinatol 2026;46:542–9.41068332
14 Isemann B, Meinzen-Derr J, Akinbi H. Maternal and neonatal factors impacting response to methadone therapy in infants treated for neonatal abstinence syndrome. J Perinatol 2011;31:25–9.20508596
15 Pritham UA, Paul JA, Hayes MJ. Opioid dependency in pregnancy and length of stay for neonatal abstinence syndrome. J Obstet Gynecol Neonatal Nurs 2012;41:180–90.22375882
16 Welle-Strand GK, Skurtveit S, Jansson LM, et al. Breastfeeding reduces the need for withdrawal treatment in opioid-exposed infants. Acta Paediatr 2013;102:1060–6.23909865
17 Meites E. Opiate exposure in breastfeeding newborns. J Hum Lact 2007;23:13.17293546
18 Philipp BL, Merewood A, O'Brien S. Methadone and breastfeeding: New horizons. Pediatrics 2003;111:1429–30.12777563
19 Oei J, Lui K. Management of the newborn infant affected by maternal opiates and other drugs of dependency. J Paediatr Child Health 2007;43:9–18.17207049
20 MacVicar S, Humphrey T, Forbes-McKay KE. Breastfeeding and the substance-exposed mother and baby. Birth 2018;45:450–8.29411890
21 McQueen K, Taylor C, Murphy-Oikonen J. Systematic review of newborn feeding method and outcomes related to neonatal abstinence syndrome. J Obstet Gynecol Neonatal Nurs 2019;48:398–407.31034790
22 Wachman EM, Schiff DM, Silverstein M. Neonatal abstinence syndrome: Advances in diagnosis and treatment. JAMA 2018;319:1362–74.29614184
23 Kreek MJ, Schecter A, Gutjahr CL, et al. Analyses of methadone and other drugs in maternal and neonatal body fluids: Use in evaluation of symptoms in a neonate of mother maintained on methadone. Am J Drug Alcohol Abuse 1974;1:409–19.4619541
24 Blinick G, Inturrisi CE, Jerez E, et al. Methadone assays in pregnant women and progeny. Am J Obstet Gynecol 1975;121:617–21.1115163
25 Kreek MJ. Methadone disposition during perinatal period in humans. Pharmcol Biochem Behav 1979;11 (Suppl):7–13.550136
26 Geraghty B, Graham EA, Logan B, et al. Methadone levels in breast milk. J Hum Lact 1997;13:227–30.9341416
27 Robinson JS, Catlin DH, Barrett CT. Withdrawal from methadone by breast feeding. In: Stern L, Salle B, Friis-Hansen B, eds. Intensive care in the newborn, III New York: Masson; 1979:213–8.
28 Pond SM, Kreek MJ, Tong TG, et al. Altered methadone pharmacokinetics in methadone-maintained pregnant women. J Pharmacol Exp Ther 1985;233:1–6.3981450
29 Wojnar-Horton RE, Kristensen JH, Yapp P, et al. Methadone distribution and excretion into breast milk of clients in a methadone maintenance programme. Br J Clin Pharmacol 1997;44:543–7.9431829
30 McCarthy JJ, Posey BL. Methadone levels in human milk. J Hum Lact 2000;16:115–20.11153342
31 Ho T, Selby P, Kapur B, et al. Pharmacokinetics of methadone in breast milk. Clin Pharmacol Ther 2001;69:P51. doi:10.1016/S0009‐9236(01)90087‐6a
32 Begg EJ, Malpas TJ, Hackett LP, et al. Distribution of R- and S-methadone into human milk during multiple, medium to high oral dosing. Br J Clin Pharmacol 2001;52:681–85.11736879
33 Jansson LM, Choo RE, Harrow C, et al. Concentrations of methadone in breast milk and plasma in the immediate perinatal period. J Hum Lact 2007;23:184–90.17478871
34 Jansson LM, Choo R, Velez ML, et al. Methadone maintenance and long-term lactation. Breastfeed Med 2008;3:34–7.18333767
35 Nikolaou PD, Papoutsis II, Maravelias CP, et al. Development and validation of an EI-GC-MS method for the determination of methadone and its major metabolites (EDDP and EMDP) in human breast milk. J Anal Toxicol 2008;32:478–84.18713515
36 Bogen DL, Perel JM, Helsel JC, et al. Estimated infant exposure to enantiomer-specific methadone levels in breastmilk. Breastfeed Med 2011;6:377–84.21348770
37 Jansson LM, Choo R, Velez ML, et al. Methadone maintenance and breastfeeding in the neonatal period. Pediatrics 2008;121:106–14.18166563
38 Madadi P, Kelly LE, Ross CJ, et al. Forensic investigation of methadone concentrations in deceased breastfed infants. J Forensic Sci 2016;61:576–80.26513313
39 Smialek JE, Monforte JR. Toxicology and sudden infant death. J Forensic Sci 1977;22:757–62.618000
40 Smialek JE, Monforte JR, Aronow R, et al. Methadone deaths in children: A continuing problem. JAMA 1977;238:2516–7.578886
41 Malpas TJ, Horwood J, Darlow BA. Breastfeeding reduces the severity of neonatal abstinence syndrome. J Paediatr Child Health 1997;33:A38.
42 Malpas TJ, Darlow BA. Neonatal abstinence syndrome following abrupt cessation of breastfeeding. N Z Med J 1999;112:12–3.10073159
43 Arlettaz R, Kashiwagi M, Das-Kundu S, et al. Methadone maintenance program in pregnancy in a Swiss perinatal center (II): Neonatal outcome and social resources. Acta Obstet Gynecol Scand 2005;84:145–50.15683374
44 Meyer D, Tobias JD. Adverse effects following the inadvertent administration of opioids to infants and children. Clin Pediatr (Phila) 2005;44:499–503.16015396
45 Abdel-Latif ME, Pinner J, Clews S, et al. Effects of breast milk on the severity and outcome of neonatal abstinence syndrome among infants of drug-dependent mothers. Pediatrics 2006;117:e1163–9.16740817
46 Miles J, Sugumar K, Macrory F, et al. Methadone-exposed newborn infants: Outcome after alterations to a service for mothers and infants. Child Care Health Dev 2007;33:206–12.17291325
47 Lim S, Prasad MR, Samuels P, et al. High-dose methadone in pregnant women and its effect on duration of neonatal abstinence syndrome. Am J Obstet Gynecol 2009;200:70.e1–5.18976737
48 Dryden C, Young D, Hepburn M, et al. Maternal methadone use in pregnancy: Factors associated with the development of neonatal abstinence syndrome and implications for healthcare resources. BJOG 2009;116:665–71.19220239
49 West PL, Mckeown NJ, Hendrickson RG. Methadone overdose in a breast-feeding toddler. Clin Toxicol (Phila) 2009;47:721. doi:10.1080/15563650903076924
50 McQueen KA, Murphy-Oikonen J, Gerlach K, et al. The impact of infant feeding method on neonatal abstinence scores of methadone-exposed infants. Adv Neonatal Care 2011;11:282–90.22123351
51 Dryden C, Young D, Campbell N, et al. Postnatal weight loss in substitute methadone-exposed infants: Implications for the management of breast feeding. Arch Dis Child Fetal Neonatal Ed 2012;97:F214–6.20656717
52 Hodgson ZG, Abrahams RR. A rooming-in program to mitigate the need to treat for opiate withdrawal in the newborn. J Obstet Gynaecol Can 2012;34:475–81.22555142
53 Metz VE, Comer SD, Pribasnig A, et al. Observational study in an outpatient clinic specializing in treating opioid-dependent pregnant women: Neonatal abstinence syndrome in infants exposed to methadone-, buprenorphine- and slow-release oral morphine. Heroin Addict Relat Clin Probl 2015;17:5–15. https://www.heroinaddictionrelatedclinicalproblems.org/harcp-archives.php?year=2015
54 Liu A, Juarez J, Nair A, et al. Feeding modalities and the onset of the neonatal abstinence syndrome. Front Pediatr 2015;3:14.25767791
55 Short VL, Gannon M, Abatemarco DJ. The association between breastfeeding and length of hospital stay among infants diagnosed with neonatal abstinence syndrome: A population-based study of in-hospital births. Breastfeed Med 2016;11:343–9.27529500
56 Wachman EM, Hayes MJ, Sherva R, et al. Association of maternal and infant variants in PNOC and COMT genes with neonatal abstinence syndrome severity. Am J Addict 2017;26:42–9.27983768
57 Beauchamp GA, Hendrickson RG, Horowitz BZ, et al. Exposures through breast milk: An analysis of exposure and information calls to U.S. poison centers, 2001-2017. Breastfeed Med 2019;14:508–12.31211594
58 Patricelli CJ, Gouin IJ, Gordon S, et al. Breastfeeding on injectable opioid agonist therapy: A case report. J Addict Med 2022;7:222–6.36001061
59 Heerfordt IM, Gotfredsen DR, Horwitz H, et al. EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431–6.40190021
60 Tolis G, Dent R, Guyda H. Opiates, prolactin, and the dopamine receptor. J Clin Endocrinol Metab 1978;47:200–3.263291
61 Lejeune C, Aubisson S, Simmat-Durand L, et al. Withdrawal syndromes of newborns of pregnant drug abusers maintained under methadone or high-dose buprenorphine: 246 cases. Ann Med Interne (Paris) 2001;152 (Suppl 7):21–7.11965095
62 Sharpe C, Kuschel C. Outcomes of infants born to mothers receiving methadone for pain management in pregnancy. Arch Dis Child Fetal Neonatal Ed 2004;89:F33–6.14711851
63 Bennett J, Whale R. Galactorrhoea may be associated with methadone use. BMJ 2006;332:1071.16675813
64 Wachman EM, Byun J, Philipp BL. Breastfeeding rates among mothers of infants with neonatal abstinence syndrome. Breastfeed Med 2010;5:159–64.20658895
65 Gawronski KM, Prasad MR, Backes CR, et al. Neonatal outcomes following in utero exposure to buprenorphine/naloxone or methadone. SAGE Open Med 2014;2:2050312114530282.26770721
66 Yonke N, Maston R, Weitzen S, et al. Breastfeeding intention compared with breastfeeding postpartum among women receiving medication-assisted treatment. J Hum Lact 2019;35:71–9.29723483
67 Skiba B, Feldman A. Factors associated with breastfeeding among mothers being treated with opiates. J Invest Med 2022;70:1191. doi:10.1136/jim-2022-ERM.275

## Substance Identification

### Substance Name

Methadone

### CAS Registry Number

76-99-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Antitussive Agents